# Avatrombopag

CASRN: 570406-98-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of avatrombopag during breastfeeding. The manufacturer recommends avoiding breastfeeding during the use of avatrombopag and for at least 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Avatrombopag

### CAS Registry Number

570406-98-3

### Drug Class

Breast Feeding

Lactation

Receptors, Thrombopoietin